# Vasopressin

CASRN: 11000-17-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of vasopressin (arginine vasopressin) during breastfeeding. However, a vasopressin derivative, desmopressin results in only small increases in milk arginine vasopressin levels.[1] Because vasopressin is not orally absorbed it is unlikely to adversely affect the breastfed infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Desmopressin

### References

1 Burrow GN, Wassenaar W, Robertson GL, et al. (1981). DDAVP treatment of diabetes insipidus during pregnacy and the post-partum period. Acta Endocrinol (Copenh).

## Substance Identification

### Substance Name

Vasopressin

### CAS Registry Number

11000-17-2

### Drug Class

Breast Feeding

Lactation

Vasopressins

Arginine Vasopressin